# Gadopentetate

CASRN: 80529-93-7

## Drug Levels and Effects

### Summary of Use during Lactation

Gadopentetate has been withdrawn from the market in the US and several other countries. Amounts of gadolinium excreted into breastmilk after maternal gadopentetate are less than 1% of the amount allowed to be given to infants. In addition, because gadopentetate is poorly absorbed orally, it is not likely to reach the bloodstream of the infant or cause any adverse effects in breastfed infants. Gadopentetate releases more free gadolinium than some other gadolinium-containing contrast agents. Some European guidelines recommend a 24-hour interruption of breastfeeding after a dose, but guidelines developed by North American professional organizations state that breastfeeding need not be disrupted after a nursing mother receives a gadolinium-containing contrast medium.[1-4]

### Drug Levels

Maternal Levels. A lactating woman who was weaning her infant (time postpartum not stated) was given an intravenous dose of 5.8 mmol (5.4 g) of gadopentetate dimeglumine which was equivalent to 0.1 mmol/kg. Samples of expressed breastmilk were obtained 6 times during the following 32.7 hours with the mother trying to completely empty the breasts at each time. Milk was analyzed for elemental gadolinium. The highest amount of gadolinium in milk of 5.1 micromoles/L was detected at 4.8 hours after the dose. At 22 hours after the dose, milk levels were less than 1 micromole/L. About 0.66 micromole (0.6 mg) of gadopentetate was excreted over the time of milk collection. This amounted to about 0.01% of the mother's total (not weight-adjusted) dose.[5]

A mother who was 13 weeks postpartum was given an intravenous dose of 7 mmol (6.6 g) of gadopentetate dimeglumine which was equivalent to 0.1 mmol/kg. Breastmilk was collected from each breast at 2, 11, 17 and 24 hours after the dose. Milk was analyzed for elemental gadolinium. The highest amounts in milk were in the 2-hour sample, having 2.8 and 3.4 micromoles/L (2.6 and 3.2 mg/L) in the milk from each breast respectively. At 11 hours, the values were 2.8 and 2.9 micromoles/L; by hour 17, the amounts in milk were at or below the detection limit of about 1 micromole/L. The authors estimated that 1.6 micromoles (1.5 mg) or 0.023% of the maternal dose (not weight-adjusted) would be excreted in the 24 hours after administration.[6]

Nineteen women received intravenous gadopentetate, in a dose of 0.1 mmol/kg (n = 18) or 0.2 mmol/kg (n = 1). The mothers withheld nursing for 24 hours and emptied both breasts completely at times chosen by the mother based on her own normal breastfeeding times. For the 18 subjects who received the lower dose, the average dose in milk was 5.9 mmol (range 4.8 to 7.4 mmol). The woman who received double the dose had milk gadolinium excretion in the same range as the others. Milk was analyzed for elemental gadolinium. The time of the peak gadolinium level in milk varied between 1 and 8 hours after the dose in 15 of the women; in 3 women, the peak values occurred at 9, 11 and 13 hours after the dose. The total amount excreted in milk averaged 0.57 micromole (range 0.052 to 3 micromoles). The average amount excreted was 0.009% of the administered dose (range 0.001 to 0.4%). The authors concluded that breastfed infants would ingest less than 1% of the usual maximal neonatal dose of 0.2 mmol/kg and that this dose would not warrant discontinuing breastfeeding after gadopentetate administration.[7]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Gadobutrol, Gadoteridol, Gadoterate

### References

1 Copel J, El-Sayed Y, Heine RP, et al. Committee Opinion No. 723: Guidelines for diagnostic imaging during pregnancy and lactation. Obstet Gynecol 2017;130:e210-e6 28937575
2 American College of Radiology Committee on Drugs and Contrast Media. Administration of contrast media to breast-feeding mothers. In, ACR manual on contrast media. 2023;Version 2023:120-1. https://www.acr.org/Clinical-Resources/Contrast-Manual
3 European Society of Urogenital Radiology. ESUR guidelines on contrast media. 2018;Version 10.0.http://www.esur-cm.org/index.php/en/
4 Bookwalter CA, McDonald RJ, Packard AT, et al. Contrast media in pregnant and lactating patients, from the AJR special series on contrast media. AJR Am J Roentgenol 2024;224:e2431415 39046138
5 Schmiedl U, Maravilla KR, Gerlach R, et al. Excretion of gadopentetate dimeglumine in human breast milk. AJR 1990;154:1305-6 2110745
6 Rofsky NM, Weinreb JC, Litt AW. Quantitative analysis of gadopentetate dimeglumine excreted in breast milk. J Magn Reson Imaging 1993;3:131-2 8428080
7 Kubik-Huch RA, Gottstein NM, Frenzel T, et al. Gadopentetate dimeglumine excretion into human breast milk during lactation. Radiology 2000;216:555-8 10924585

## Substance Identification

### Substance Name

Gadopentetate

### CAS Registry Number

80529-93-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contrast Media

Diagnostic Agents